# Anthrax Immune Globulin Intravenous (Human)

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of anthrax immune globulin during breastfeeding. Anthrax immune globulin is an immune globulin (IgG) rich in IgG antibodies against Bacillus anthracis toxins. IgG is a normal component of breastmilk that is likely to be partially destroyed in the infant's gastrointestinal tract and poorly absorbed by the infant during breastfeeding. Anthrax immune globulin can be given intravenously to infants weighing less than 5 kg. No special precautions are required during breastfeeding.[1]

Women with active skin lesions from anthrax on the breast should avoid infant contact with the affected breast and not breastfeed from that breast until 48 hours after appropriate antimicrobial therapy has been initiated. Expressed breastmilk can be used safely if hygiene and protective precautions were taken during expression, including handwashing and ensuring that no lesions come in contact with pump equipment if using a pump.[1]

### Drug Levels

Maternal Levels. Colostrum (3 days postpartum) and milk (7 days postpartum) samples from 2 mothers who were receiving intravenous immunoglobulin (IVIG) for the treatment of common variable immunodeficiency were studied. One mother was receiving 400 to 500 mg/kg of IVIG monthly and the other received 600 to 700 mg/kg of IVIG monthly. The time of the last dose before sample collection was not reported. Immune globulin G (IgG) concentrations were normal in the first mother's colostrum and milk and higher than normal in the colostrum of the second mother. IgM levels were normal in the colostrum and milk first mother and low in the second.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Leslie S, Ververs M. Chemical and biological threats: Guidance for breastfeeding women, infants, and young children. Health Secur 2024;22:172-81.38416870
2 Palmeira P, Costa-Carvalho BT, Arslanian C, et al. Transfer of antibodies across the placenta and in breast milk from mothers on intravenous immunoglobulin. Pediatr Allergy Immunol 2009;20:528-35.19220771

## Substance Identification

### Substance Name

Anthrax Immune Globulin Intravenous (Human)

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies

Immunoglobulin G

Immunoglobulins